# Colistimethate

CASRN: 12705-41-8

## Drug Levels and Effects

### Summary of Use during Lactation

Limited data indicate that colistin is minimally excreted into breastmilk following intramuscular administration of colistimethate. Because colistin is poorly absorbed orally, it is unlikely to be absorbed in appreciable amounts by the infant or adversely affect the breastfed infant. However, no studies have evaluated serum levels or adverse effects in breastfed infants whose mothers were receiving colistimethate. Breastfeeding is acceptable with the use of inhaled colistin or colistimethate.[1]

### Drug Levels

Maternal Levels. A single dose of colistimethate equal to 33 mg of colistin was given intramuscularly to 9 women and milk levels were measured once in each woman over the next 3 hours. Milk concentrations were 740 mcg/L at 1 hour (n = 1), 760 mcg/L at 2 hours (n = 3) and 140 mcg/L at 3 hours (n = 5) after the dose. Another 20 women were given single intramuscular doses equivalent to 66 mg of colistin. Milk concentrations averaged 500 mcg/L (range 160 to 1100 mcg/L) at 1 hour after the dose, and 789 mcg/L at 2 hours after the dose (range 0 to 2100 mcg/L).[2]

Colistimethate was given to 15 women intramuscularly on day 5 postpartum in a dose equivalent to 66 mg of colistin. After 2 doses, the average peak level was 165 mcg/L and trough was 50 mcg/L. Another 5 women were given a dose equivalent to 132 mg of colistin intramuscularly on day 5 postpartum. After 2 doses, the average peak level was 215 mcg/L and trough was 50 mcg/L. With both doses, peak milk levels occurred 5 hours after the dose.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Amikacin, Gentamicin, Imipenem and Cilastatin, Tobramycin

### References

1 Middleton PG, Gade EJ, Aguilera C, et al. ERS/TSANZ Task Force Statement on the management of reproduction and pregnancy in women with airways diseases. Eur Respir J 2020;55:1901208.31699837
2 Moiraghi A, Moiraghi P. Colistin in organic fluids. In, Herold M, Gabriel Z, eds. Antibiotics: advances in research, production and clinical use; proceedings of the Congress on Antibiotics held in Prague, 15-19 June, 1964 1966:188-92.
3 Borderon E, Soutoul JH, Borderon JC, et al. Excretion of antibiotics in human milk. Med Mal Infect 1975;5:373-6.

## Substance Identification

### Substance Name

Colistimethate

### CAS Registry Number

12705-41-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Polymyxins